# Biperiden

CASRN: 514-65-8

## Drug Levels and Effects

### Summary of Use during Lactation

Biperiden is no longer marketed in the United States. No information is available on the use of biperiden during breastfeeding. Long-term use of biperiden might reduce milk production or milk letdown, but a single dose is not likely to interfere with breastfeeding. During long-term use, observe for signs of decreased lactation (e.g., insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a study in 5 healthy nonlactating subjects (3 male, 2 female), 5 mg of biperiden was infused intravenously over 2 hours. Serum prolactin was measured 7 times during the infusion and two times afterwards. Although the average serum prolactin value deceased slightly by 120 minutes, the difference was not statistically significant. The average serum prolactin rebounded to approximately baseline at 2 hours after the end of the infusion.[1]

### References

1 Masturzo P, Carolei A, Gianrossi R, et al. Effect of an anticholinergic drug, biperiden, on serum prolactin levels in humans. Boll Soc Ital Biol Sper 1976;52:819–23.1016635

## Substance Identification

### Substance Name

Biperiden

### CAS Registry Number

514-65-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Parasympatholytics

Muscarinic Antagonists